# Atazanavir

CASRN: 198904-31-3

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of atazanavir in milk appear to be low based on limited data. The combination product, which also contains the CYP3A inhibitor cobicistat, has not been studied during breastfeeding, but would be expected to have similar or greater levels of atazanavir in milk. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[1,2]

### Drug Levels

Maternal Levels. Three women taking atazanavir (dose not stated, but presumably 300 mg daily) as part of their highly active antiretroviral regimen had sampling of breastmilk and plasma on postpartum days 5 and 14 at 0, 2, 5, 8 and 24 hours after a dose. Median breastmilk levels over 24 hours were 212 mcg/L on day 5 and 265 mcg/L on day 14. Median peak breastmilk levels of 419 mcg/L occurred at 5 hours after the dose.[3]

Fourteen breastfeeding women with HIV were receiving ritonavir 100 mg and atazanavir 300 mg daily, as part of a multi-drug regimen. Milk samples were collected at three postpartum visits: 5 to 9 days postpartum, 2 to 12 weeks postpartum, and 16 to 24 weeks postpartum. The median breastmilk atazanavir concentrations were 432 mcg/L (IQR 126, 633 mcg/L) at a median time of 17.2 hours (IQR 14.5, 18.9 hours) between the dose and sample collection. The median atazanavir RID was 1.27% (maximum 6.43%).[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Fourteen exclusively breastfeeding women with HIV were receiving ritonavir 100 mg and atazanavir 300 mg daily, as part of a multi-drug regimen. Thirteen of fourteen infants received nevirapine-based prophylaxis. No infant experienced a Grade 3 or higher event or serious adverse event. Three infants (21%) experienced Grade 2 adverse events: one with viral rhinitis (16.6 weeks), one with a chest abscess (7.4 weeks), and one with pruritus and papular rash (4.9 weeks). None of the reported events were considered to be related to atazanavir-ritonavir exposure via breastmilk.[4]

### Effects on Lactation and Breastmilk

Gynecomastia has been reported among men receiving highly active antiretroviral therapy. Gynecomastia is unilateral initially, but progresses to bilateral in about half of cases. No alterations in serum prolactin were noted and spontaneous resolution usually occurred within one year, even with continuation of the regimen.[5-7] Some case reports and in vitro studies have suggested that protease inhibitors might cause hyperprolactinemia and galactorrhea in some male patients,[8,9] although this has been disputed.[10] The relevance of these findings to nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
2 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
3 Spencer L, Neely M, Mordwinkin N, . Intensive pharmacokinetics of zidovudine, lamivudine and atazanavir and HIV-1 viral load in breast milk and plasma of HIV + women receiving HAART. 16th Conference on Retroviruses and Opportunistic Infections Montreal, Canada 2009:942.
4 Barr EA, Pinilla M, Momper JD, . Breastmilk transfer and infant exposure to atazanavir/ritonavir in breastfeeding women with HIV: results from IMPAACT 2026. Front Reprod Health 2026;8:1892081.42666560
5 García-Benayas T, Blanco F, Martin-Carbonero L, . Gynecomastia in HIV-infected patients receiving antiretroviral therapy. AIDS Res Hum Retroviruses 2003;19:739-41.14585204
6 Pantanowitz L, Evans D, Gross PD, . HIV-related gynecomastia. Breast J 2003;9:131-2.12603389
7 Evans DL, Pantanowitz L, Dezube BJ, . Breast enlargement in 13 men who were seropositive for human immunodeficiency virus. Clin Infect Dis 2002;35:1113-9.12384846
8 Hutchinson J, Murphy M, Harries R, . Galactorrhoea and hyperprolactinaemia associated with protease-inhibitors. Lancet 2000;356:1003-4.11041407
9 Orlando G, Brunetti L, Vacca M. Ritonavir and saquinavir directly stimulate anterior pituitary prolactin secretion, in vitro. Int J Immunopathol Pharmacol 2002;15:65-8.12593790
10 Montero A, Bottasso OA, Luraghi MR, . Galactorrhoea, hyperprolactinaemia, and protease inhibitors. Lancet 2001;357:473-5.

## Substance Identification

### Substance Name

Atazanavir

### CAS Registry Number

198904-31-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

HIV Protease Inhibitors